# Sodium Zirconium Cyclosilicate

CASRN: 17141-74-1

## Drug Levels and Effects

### Summary of Use during Lactation

Because sodium zirconium cyclosilicate is not orally absorbed it is unlikely to reach the breastmilk or adversely affect the breastfed infant. No special precautions are required.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Sodium Zirconium Cyclosilicate

### CAS Registry Number

17141-74-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cation Exchange Resins

Chelating Agents